# Methoxsalen

CASRN: 298-81-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of methoxsalen during breastfeeding. Expert opinion indicates that due to the photosensitizing effects of methoxsalen, breastfeeding should be withheld for 24 hours after an oral dose to allow for 95% of the drug to be eliminated in the mother's urine.[1-3] The same precaution probably applies to patients receiving methoxsalen as a part of therapy for cutaneous T-cell lymphoma. Use of topical methoxsalen is not contraindicated during breastfeeding, but avoid direct contact of the treated skin with the skin of the infant.[4,5]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Menter A, Korman NJ, Elmets CA, et al. Guidelines of care for the management of psoriasis and psoriatic arthritis: Section 5. Guidelines of care for the treatment of psoriasis with phototherapy and photochemotherapy. J Am Acad Dermatol 2010;62:114–35.19811850
2 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651–68.38280680
3 Moore H, Stevenson A. Breast and nipple dermatoses during lactation. Australas J Dermatol 2025;66:e386–e407.40817612
4 Reed BR. Dermatologic drug use during pregnancy and lactation. Dermatol Clin 1997;15:197–206.9001872
5 Reed BR. Dermatologic drugs, pregnancy, and lactation. A conservative guide. Arch Dermatol 1997;133:894–8.9236528

## Substance Identification

### Substance Name

Methoxsalen

### CAS Registry Number

298-81-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatologic Agents

Photosensitizing Agents

Coumarins

Furocoumarins

Psoralens

PUVA Therapy